# Belinostat

CASRN: 866323-14-0

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of belinostat during breastfeeding. Because belinostat is >92% bound to plasma proteins, amounts in milk are likely to be low. The manufacturer states that breastfeeding is not recommended during treatment with belinostat, and for 2 weeks after the last dose.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Belinostat

### CAS Registry Number

866323-14-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antineoplastic Agents

Histone Deacetylase Inhibitors